# Lenacapavir

CASRN: 2189684-44-2

## Drug Levels and Effects

### Summary of Use during Lactation

Infant exposure to lenacapavir during breastfeeding is minimal.[1] If a mother requires lenacapavir, it is not a reason to discontinue breastfeeding. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[2,3] Extended postnatal prophylaxis of breastfed infants with lenacapavir should continue until breastfeeding is stopped.[4]

### Drug Levels

Maternal Levels. In a study of lenacapavir prophylaxis for HIV, mothers received subcutaneous lenacapavir 927 mg in two 1.5 mL injections every 26 weeks following a 600 mg oral loading dose. In 102 mothers, the median breastmilk concentration of lenacapavir was 31.8 mcg/L (IQR 121.4 to 53.2 mcg/L).[1]

Infant Levels. The manufacturer reports a study in which the median infant-to-mother plasma ratio for lenacapavir in infants (n = 10) who were breastfed by participants receiving lenacapavir from 0 to less than 13 weeks after delivery was 0.06 (range 0.01 to 0.20).

In a study of HIV prophylaxis, women received subcutaneous lenacapavir 927 mg in two 1.5 mL injections every 26 weeks following a 600 mg oral loading dose. In 98 breastfed infants who were 10 to 187 days postpartum, the median plasma concentration was 1.63 mcg/L (IQR 0.87 to 2.85 mcg/L). The median infant-to-maternal plasma ratio for lenacapavir was 0.02, or 5% of the maternal serum concentrations (n = 98). However, the authors point out that results were not categorized by breastfeeding exclusivity or intensity, and these data might not capture peak exposures for exclusively breastfed infants during maternal peak plasma concentrations.[1]

The manufacturer the median infant-to-mother plasma ratio for lenacapavir in infants (n=10) who were breastfed by individuals receiving lenacapavir from 0 to less than 13 weeks after delivery was 0.06 (range: 0.01 to 0.20).

### Effects in Breastfed Infants

In a 2-year study, mothers received lenacapavir subcutaneous lenacapavir 927 mg in two 1.5 mL injections every 26 weeks following a 600 mg oral loading dose. No adverse effects of lenacapavir were observed in their breastfed infants, although the intensity of breastfeeding was not recorded.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Bekker LG, Moodley D, Diallo DD, . HIV acquisitions, safety, and pharmacokinetics of lenacapavir for HIV pre-exposure prophylaxis in pregnant and lactating women (PURPOSE 1): A substudy of a phase 3, randomised controlled trial. Lancet HIV 2026;13:e621-e30.42442378
2 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
3 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
4 Van de Perre P, Moles JP, Nagot N. HIV postnatal prophylaxis: How long is long enough? Expert Rev Anti Infect Ther 2025;23:1075-81.41216942

## Substance Identification

### Substance Name

Lenacapavir

### CAS Registry Number

2189684-44-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

HIV capsid inhibitors